# Levofloxacin

CASRN: 100986-85-4

## Drug Levels and Effects

### Summary of Use during Lactation

Levofloxacin amounts in breastmilk appear to be considerably lower than the infant dose and would not be expected to cause any serious adverse effects in breastfed infants. Fluoroquinolones such as levofloxacin have traditionally not been used in infants because of concern about adverse effects on the infants' developing joints. However, more recent studies indicate little risk.[1,2] The calcium in milk might prevent absorption of the small amounts of fluoroquinolones in milk,[3] but insufficient data exist to prove or disprove this assertion. Use of levofloxacin is acceptable in nursing mothers with monitoring of the infant for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash). Avoiding breastfeeding for 1 hour or more after an intravenous dose and 4 to 6 hours after an oral dose should decrease the exposure of the infant to levofloxacin in breastmilk. Maternal use of eye drops that contain levofloxacin presents negligible risk for the nursing infant.

### Drug Levels

Maternal Levels. One woman was given levofloxacin 500 mg daily intravenously for 9 days, then orally for 17 days. Twenty-six breastmilk samples were obtained, beginning on day 10 of therapy and continued for 6 days after the discontinuation of therapy. A pharmacokinetic model that was developed predicted that a peak milk level of 8.2 mg/L would occur 5 hours after the dose. The milk levels fell with an estimated half-life of 7 hours. Traces of levofloxacin were still detectable in breastmilk 65 hours after the dose. The authors calculated that an exclusively breastfed infant whose mother was taking 500 mg daily would receive 1.25 mg daily in breastmilk, which is far below the dose of levofloxacin used in children.[4]

Two nursing mothers each took one 500 mg capsule of levofloxacin (Tavanic-Sanofi, Istanbul) orally. Eleven complete collections of breastmilk were taken over the following 24 hours. Peak levofloxacin milk levels of 265 and 258 mcg/L occurred at 2.5 and 3 hours, respectively, in the two mothers. Average milk levels were 101 and 105, mcg/L, respectively. The half-lives in milk were 4.95 and 5.33 hours, respectively.[5] Using the average milk levels, a fully breastfed infant would receive an average of 15.5 mcg/kg daily.

Five women with atypical pneumonia were receiving intravenous levofloxacin 400 mg once daily. Milk samples were collected at 0.5, 1, 2, 4, 6, 8, 10, 12, and 24 hours after the last dose of the drug. The peak milk level averaged 14.6 mg/L and occurred at 0.5 hours after the dose. The half-life in milk averaged 4.57 hours. The daily infant dosage was 0.4 mcg/kg for exclusively breastfed infants, which is less than 10% of the recommended therapeutic dose for 0 to 12-month-old infants (10 mg/kg once daily). This translated into an average relative infant dose of 6.1%. The authors recommended waiting for 1 hour or longer after a dose to resume breastfeeding after a dose to reduce the infant exposure. Five other women who collected milk samples unsupervised at unclear times had a calculated average RID of 8.2%.[6]

Using the pooled results from two clinical trials, 98 breastmilk samples were collected from 20 women pre-dose, and at 2, 4, 6 and 8 hours after the dose at 5 to 12 weeks postpartum and after 4 or more weeks of levofloxacin therapy initiated during pregnancy for rifampicin-resistant tuberculosis . Some opportunistic samples were also obtained 6 to 12 months postpartum. A population pharmacokinetic model was built using NONMEM. The model showed rapid equilibration between maternal plasma and milk, with a half-life of 7.5 minutes. The median peak milk concentration was 16.9 mg/L. The estimated daily amount of levofloxacin excreted into breastmilk ranged from 3.82 to 10.8 mg, which resulted in an RID of about 6%.[7]

Infant Levels. Thirteen breastfed (6 exclusive, 7 mixed) infants with a median age of 6.97 weeks had serum samples (15 total) taken while their mothers were receiving levofloxacin 750 or 1000 mg daily. Eighty percent of the concentrations were above the level of quantification, with most below 1 mg/L. The highest was about 4 mg/L and another was about 2.5 mg/L.[8]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Systemic) Ciprofloxacin; (Ophthalmic) Ciprofloxacin, Ofloxacin

### References

1 Gürpinar AN, Balkan E, Kiliç N, et al. The effects of a fluoroquinolone on the growth and development of infants. J Int Med Res 1997;25:302–6.9364293
2 van den Oever HL, Versteegh FG, Thewessen EA, et al. Ciprofloxacin in preterm neonates: Case report and review of the literature. Eur J Pediatr 1998;157:843–5.9809826
3 Fleiss PM. The effect of maternal medications on breast-feeding infants. J Hum Lact 1992;8:7.1558663
4 Cahill JB, Jr, Bailey EM, Chien S, et al. Levofloxacin secretion in breast milk: A case report. Pharmacotherapy 2005;25:116–8.15767227
5 Toker SE, Kızılçay GE, Sagirli O. Determination of levofloxacin by HPLC with fluorescence detection in human breast milk. Bioanalysis 2021;13:1063–70.34100294
6 Shang J, Pang L, Long J, et al. An observational study on the pharmacokinetics of levofloxacin in lactating atypical pneumonia patients. Breastfeed Med 2025;20:666–71.40675777
7 Sawe S, Tsirizani L, Mkhize B, et al. Population pharmacokinetics of levofloxacin in breastmilk in patients with rifampicin-resistant tuberculosis. Br J Clin Pharmacol 2025 41330388
8 Pentland B, Sawers JS. Galactorrhoea after withdrawal of bromocriptine. Br Med J 1980;281:716.7191752

## Substance Identification

### Substance Name

Levofloxacin

### CAS Registry Number

100986-85-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Quinolones

Fluoroquinolones